# Desmopressin

CASRN: 16679-58-6

## Drug Levels and Effects

### Summary of Use during Lactation

Desmopressin from a nasal spray is excreted in negligible amounts into milk and is poorly absorbed orally by the infant, so it appears acceptable to use during breastfeeding. There is no published experience with sublingual desmopressin during breastfeeding. Until more data become available, sublingual desmopressin should be used with caution during breastfeeding, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. In a patient who was using intranasal desmopressin 10 mcg twice daily for diabetes insipidus, serum and milk levels of arginine vasopressin were measured after a dose.[1] Milk levels gradually increased from the background level of 1 ng/L to about 1.5 ng/L over the 4-hour observation period.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Several cases have been reported of mothers with diabetes insipidus using desmopressin and breastfeeding their infants.[2-4] In one case, the mother discontinued nursing after 2 weeks because of a low milk supply, but this was not clearly drug related.[3] Lactation sometimes improves diabetes insipidus and reduces desmopressin requirements.[2,3]

### References

1 Burrow GN, Wassenaar W, Robertson GL, et al. (1981). DDAVP treatment of diabetes insipidus during pregnacy and the post-partum period. Acta Endocrinol (Copenh).
2 Hadi HA, Mashini IS, Devoe LD. (1985). Diabetes insipidus during pregnancy complicated by preeclampsia. A case report. J Reprod Med.
3 Hime MC, Richardson JA. (1978). Diabetes insipidus and pregnancy. Case report, incidence and review of literature. Obstet Gynecol Surv.
4 Wallia A, Bizhanova A, Huang W, et al. (2013). Acute diabetes insipidus mediated by vasopressinase after placental abruption. J Clin Endocrinol Metab.

## Substance Identification

### Substance Name

Desmopressin

### CAS Registry Number

16679-58-6

### Drug Class

Breast Feeding

Lactation

Hemostatics

Vasopressins